# Lonapegsomatropin

CASRN: 1934255-39-6

## Drug Levels and Effects

### Summary of Use during Lactation

Lonapegsomatropin is a long-acting prodrug of somatropin, which has been used safely in nursing mothers. Polyethylene glycol is not excreted into breastmilk.[3] No special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date. However, somatropin has been reported to increase milk production.

### Alternate Drugs to Consider

Somatropin

## Substance Identification

### Substance Name

Lonapegsomatropin

### CAS Registry Number

1934255-39-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Human Growth Hormone